# Orphenadrine

CASRN: 83-98-7

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of orphenadrine during breastfeeding. Manufacturer’s estimates indicate that the amount in milk may be low. The drug’s anticholinergic activity might interfere with milk production. An alternate agent may be preferred.

### Drug Levels

Maternal Levels. A European manufacturer of orphenadrine estimated that with a maternal dose of 150 mg, milk orphenadrine concentration would be about 300 to 400 mcg/L.[1] This implies that the relative infant dosage might be about 1.8 to 2.4% of the mother’s weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Orphenadrine has anticholinergic activity. Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[2-6] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[7] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Chaplin S, Sanders GL, Smith JM. Drug excretion in human breast milk. Adv Drug React Ac Pois Rev 1982;1:255-87.
2 Aaron DK, Ely DG, Deweese WP, et al. Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci 1997;75:1434-42.9250502
3 Powell MR, Keisler DH. A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci 1995;73:1901-5.7592071
4 Daniel JA, Thomas MG, Powell MR, et al. Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci 1997;75:1359-62.9159285
5 Bizzarro A, Iannucci F, Tolino A, et al. Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol 1980;7:108-11.6788407
6 Svennersten K, Nelson L, Juvnäs-Moberg K. Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand 1992;145:193-4.1636447
7 Masala A, Alagna S, Devilla L, et al. Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest 1982;5:53-5.6808052

## Substance Identification

### Substance Name

Orphenadrine

### CAS Registry Number

83-98-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Cholinergic Antagonists

Muscle Relaxants, Central

Parasympatholytics

Muscarinic Antagonists